# Hawthorn

## Drug Levels and Effects

### Summary of Use during Lactation

Hawthorn (Crataegus species) leaves, fruit and flowers contain flavonoids and oligomeric proanthocyanidins. Some hawthorn products are standardized based on the content of these ingredients. Hawthorn's main use is for treating mild heart failure. One small, old study found a galactogogue effect with hawthorn flowers;[1] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[2,3] No data exist on the excretion of any components of hawthorn into breastmilk or on the safety and efficacy of hawthorn in nursing mothers or infants. Hawthorn is generally well tolerated in adults with dizziness being the most common adverse effect. It can possibly increase the effect of anticoagulants, digoxin and hypotensive medications. Other occasional reactions include nausea, fatigue, sweating, and rash. The German Commission E states that there is no known reason to contraindicate use of the flowers or leaves during breastfeeding, but the fruit should be avoided. Other sources recommend avoiding hawthorn during breastfeeding because of a lack of studies.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A group of 5 nursing mothers were given no herb for 5 days, 15 mL of a 10% infusion of Cratoegi oxyacanthi flowers orally 3 times daily for 10 days, followed by another 5-day control period from days 15 to 20. Their diet and environment were kept constant during the study period. Milk volume was measured daily and milk fat percentage was measured on days 5, 10, 15 and 20. The hawthorn flower infusion increased daily milk quantity in most nursing mothers and increased its fat content. The increase occurred towards the end of the experimental period and continued during the control period.[1] Because of the lack of randomization, blinding and controls, and small number of participants, no valid conclusion can be made from this study on the galactogogue effects of hawthorn.

### References

1 Nikolov P, Avramov NR. (1951). Izv Meditsinskite Inst Bulg Akad Naukite Sofia Otd Biol Meditsinski Nauki.
2 Brodribb W. ABM Clinical Protocol #9. (2018). Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med.
3 (2021). Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol.

## Substance Identification

### Substance Name

Hawthorn

### Scientific Name

Crataegus oxyacantha; Crataegus monogyna

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal